# Beta-Carotene

CASRN: 7235-40-7

## Drug Levels and Effects

### Summary of Use during Lactation

Beta-carotene is a plant pigment that is converted into vitamin A in the body. Maternal vitamin A requirements are increased during lactation, but there are no specific guidelines for increased beta-carotene intake or indications for high-dose supplementation in nursing mothers. Typical beta-carotene intake in a Western diet is 6 to 8 mg daily. Beta-carotene is a normal component of human colostrum and mature milk, where it contributes to antioxidant defenses in the neonate.[1] A systematic review found that in infants younger than 6 months, those fed primarily human milk have greater blood carotenoid concentrations than those fed formula.[2] Some evidence suggests that there is a correlation between beta-carotene and infant motor development in exclusively breastfed infants, but not in overall psychomotor performance.[3] Beta-carotene supplementation during pregnancy and for 6 months postpartum in nursing mothers with poor diets in a resource-poor setting reduced the number of days of illness in the mothers, but does not reduce infant morbidity or mortality according to another study.[4,5] The bioavailability of beta-carotene is dependent on the fat content of the meal and the form in which it is administered, with synthetic pharmaceutical forms having the best bioavailability. High-dose beta-carotene supplements lead to a slow increase in breastmilk beta-carotene concentrations, with an accumulation half-life of about 9 days. Levels drop towards baseline slowly over several weeks after discontinuation. In general, beta-carotene is well tolerated, although excessive maternal intake of beta-carotene can lead to a harmless, reversible discoloration of the breastfed infant's skin.[6] In HIV-infected women, high-dose beta-carotene plus vitamin A supplementation increases the rate of HIV viral shedding into breastmilk and increases HIV infection in breastfed infants, although the mortality rate over the first 2 years of life is not increased.[7,8] The viral shedding may be a result of an increase in subclinical mastitis caused by beta-carotene.[9] Beta-carotene concentration in breastmilk is not affected by refrigeration, freezing, or low-temperature microwaving. The concentration does decrease when milk passes through a tube feeding system, regardless of light exposure.[10]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. A systematic review of 47 articles found the mean concentration of beta-carotene in mature milk worldwide to be 24.6 mcg/L, which would provide an average dose of 19.2 mg daily of beta-carotene to a fully breastfed infant.[2] Some of the studies in this review are discussed in more detail below. [11-15]

Healthy nursing mothers in the United States were given either 60 mg (n = 6) or 210 mg (n = 6) of beta-carotene as capsules (Hoffmann-La Roche, Inc., Nutley, NJ) as a single dose. Both doses increased breastmilk beta-carotene levels to a similar extent, with peak concentrations of around 1.1 mcg/L of lipid occurring 2 to 3 days after the dose. Mothers with higher baseline beta-carotene levels had higher peak concentrations.[12]

Healthy nursing mothers in the United States were given either 7 doses of a placebo (n = 4) or of an algae-derived beta-carotene supplement containing 64 mg of all-trans beta-carotene and 69 mg 9-cis beta-carotene (Henkel Corp., LaGrange, Il). Foremilk samples of breastmilk were obtained daily for 8 days and again at 1 month after the first dose. All-trans beta-carotene levels in milk increased to about 2.1 mg/L of whole milk after 5 days of supplementation and further increased only slightly by day 8. Levels were still elevated above baseline at 1 month. Milk levels of 9-cis beta-carotene increased steadily from baseline to day 8, with a much lower peak value of about 40 ng/L. The lower value was possibly the result of isomerization of 9-cis beta-carotene to all-trans beta-carotene.[13]

Five healthy exclusively breastfeeding mothers over 1 month postpartum (average 279 days postpartum) in the United States were given 30 mg of beta-carotene as capsules (Hoffmann-La Roche, Inc. Nutley, NJ) daily for 28 days with high-fat yogurt. Milk beta-carotene levels increased an average of 6.4 fold over the 28-day period, with an average maximum concentration of about 200 mcg/L. The accumulation half-life of beta-carotene in milk was 9 days, which was almost twice as long as the accumulation half-life in serum. At one month after the end of supplementation, milk levels remained about double of baseline levels.[11]

In a study in rural Bangladesh, 139 mothers received oral beta-carotene 7.8 mg or placebo once daily for 9 months beginning between 1 and 3 weeks postpartum. Baseline maternal vitamin A status prior to administration was not measured. Average milk retinol levels were similar between the two groups at 3 and 6 months postpartum, but were higher in the beta-carotene group at 9 months (286 mcg/L vs 226 mcg/L). The percentage of women with milk levels <300 mcg/L was also lower (63% vs 80%) at 9 months in the beta-carotene group. The results were the same when the authors controlled for milk fat content.[16]

Twenty-one postpartum women in the United States received either water-dispersible beadlets of beta-carotene in capsules (n = 11), which were assayed to contain 31 to 35 mg of beta-carotene and 1.2 mg of alpha-carotene, or an identical placebo (n = 10) daily for 4 weeks starting on 4 days postpartum. During the 4 weeks of the study, there was no significant change in average breastmilk beta-carotene concentrations, whereas those in the placebo group had a decrease in average beta-carotene milk concentrations which as not statistically significant. Differences between this study and previous studies was suggested to be caused by differences in subjects' milkfat levels which were lower in this study.[14]

A study compared 4 groups of women in West Java, Indonesia who received supplementation during pregnancy until delivery. All groups received 30 mg of iron and 0.4 mg of folic acid daily. Experimental groups received either beta-carotene 4.5 mg daily as a water-soluble granulate, zinc 30 mg daily, beta-carotene 4.5 mg plus zinc 30 mg daily, or only the iron and folic acid as a control group. Milk samples were collected during the first and sixth months postpartum. The milk beta-carotene level was significantly different from the control group only in the 6-month sample of the zinc plus beta-carotene group. The vitamin A status of the mothers and their infants was also better in the group that received beta-carotene and zinc.[15]

A study of 866 HIV-infected women in Tanzania were enrolled in a study to receive 1 of 4 supplements during pregnancy and lactation. Groups received either multivitamins, multivitamins plus vitamin A and beta-carotene, vitamin A and beta-carotene alone, or placebo daily. The beta-carotene dose was 30 mg. At 24 months of age, the multivitamin-supplemented group's infants had significantly better growth parameters than the other groups.[17]

A study of HIV-infected women in Tanzania were enrolled in a study to receive 1 of 4 supplements during pregnancy and lactation. Groups receive either multivitamins (thiamine, riboflavin, vitamin B6, niacin, vitamin B12, vitamin C, vitamin E, and folic acid), multivitamins plus vitamin A and beta-carotene, vitamin A and beta-carotene alone, or placebo daily. The beta-carotene dose was 30 mg. Breastmilk samples were collected at delivery and at 3-month intervals thereafter. Average breastmilk beta-carotene concentrations in the beta-carotene supplemented groups were consistently about 10-fold higher than in the groups that received no beta-carotene at any time up to 1 year of age.[18]

Twelve women were given carrot paste and 14 were given tomato paste with a high-fat meal once daily for 3 days. The carrot supplement contained 15 mg of all-trans beta-carotene and the tomato supplement contained 15 mg of all-trans lycopene. Breastmilk beta-carotene levels nearly doubled after 3 days of supplementation, whereas lycopene levels increased by about 15% one day after the 3 days of supplementation.[19]

Infant Levels. A systematic review of studies on beta-carotene plasma levels of breastfed infants found that in 54 infants from 4 to 12 weeks of age in the US, the average beta-carotene plasma level was about 70 mcg/L. In studies from outside the US, 62 infants aged 1 to 26 weeks had an average beta-carotene plasma concentration of 223 mcg/L.[2]

### Effects in Breastfed Infants

A nursing mother was eating 2 to 3 pounds of carrots a week as raw and cooked carrots. The mother's skin was yellow in color, but her sclera were clear. At 2 months of age, her breastfed infant was diagnosed as having jaundice because of a yellow coloration of the skin. Breastfeeding was discontinued and the infant's skin returned to a normal color. The mother continued her diet and examination of the maternal serum found elevated levels of beta-carotene which was probably the cause of her infant's skin discoloration.[6]

HIV-infected women in Tanzania received 1 of 4 supplements during pregnancy and lactation in a series of studies. Groups received either multivitamins (thiamine, riboflavin, vitamin B6, niacin, vitamin B12, vitamin C, vitamin E, and folic acid), multivitamins plus vitamin A and beta-carotene, vitamin A and beta-carotene alone, or placebo daily. The beta-carotene dose was 30 mg. At 24 months of age, the multivitamin-supplemented group's infants had significantly better growth parameters than the other groups.[17] One study found that the infants of mothers supplemented with vitamin A and beta-carotene had a higher rate of HIV transmission than those supplemented with multivitamins alone or placebo.[7] After 6 months postpartum, women who received vitamin A plus beta-carotene had greater shedding of the HIV virus into breastmilk than women who had not; multivitamins without vitamin A and beta-carotene did not increase viral shedding.[7] Beta-carotene appeared to have a shedding effect that was independent of vitamin A.[8] One possible explanation comes from another similar study in which those who received vitamin A plus beta-carotene alone had a 45% increased risk of severe subclinical mastitis and those who received multivitamins plus vitamin A and beta-carotene had a 29% increased risk of severe subclinical mastitis.[9]

Breastmilk samples were collected at the first, third and sixth months postpartum from 39 mother-infant pairs of exclusively breastfed infants. Psychomotor testing found a correlation between beta-carotene intake in breastmilk during the first 3 months of life and infant motor development, but not overall psychomotor development, at 6 months of life. Some long-chain polyunsaturated fatty acids, DHA, alpha-linolenic acid and total n-3 PUFAs, also correlated with motor development.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Ostrea EM, Jr, Balun JE, Winkler R, et al. Influence of breast-feeding on the restoration of the low serum concentration of vitamin E and beta-carotene in the newborn infant. Am J Obstet Gynecol 1986;154:1014-7.3706423
2 Zaidi Y, Stroh R, Moran NE. Systematic review of carotenoid concentrations in human milk and infant blood. Nutr Rev 2022; 80:2029-50.35389473
3 Zielinska MA, Hamulka J, Grabowicz-Chądrzyńska I, et al. Association between breastmilk LC PUFA, carotenoids and psychomotor development of exclusively breastfed infants. Int J Environ Res Public Health 2019;16:1144.30935000
4 Christian P, West KP, Jr, Khatry SK, et al. Vitamin A or beta-carotene supplementation reduces symptoms of illness in pregnant and lactating Nepali women. J Nutr 2000;130:2675-82.11053506
5 Gogia S, Sachdev HS. Maternal postpartum vitamin A supplementation for the prevention of mortality and morbidity in infancy: A systematic review of randomized controlled trials. Int J Epidemiol 2010;39:1217-26.20522482
6 Thomson ML. Carotinaemia in a suckling. Arch Dis Child 1943;18:112.21032250
7 Fawzi WW, Msamanga GI, Hunter D, et al. Randomized trial of vitamin supplements in relation to transmission of HIV-1 through breastfeeding and early child mortality. AIDS 2002;16:1935-44.12351954
8 Villamor E, Koulinska IN, Aboud S, et al. Effect of vitamin supplements on HIV shedding in breast milk. Am J Clin Nutr 2010;92:881-6.20739426
9 Arsenault JE, Aboud S, Manji KP, et al. Vitamin supplementation increases risk of subclinical mastitis in HIV-infected women. J Nutr 2010;140:1788-92.20739447
10 Tacken KJ, Vogelsang A, van Lingen RA, et al. Loss of triglycerides and carotenoids in human milk after processing. Arch Dis Child Fetal Neonatal Ed 2009;94:F447-50.19416803
11 Canfield LM, Giuliano AR, Neilson EM, et al. Kinetics of the response of milk and serum beta-carotene to daily beta-carotene supplementation in healthy, lactating women. Am J Clin Nutr 1998;67:276-83.9459376
12 Canfield LM, Giuliano AR, Neilson EM, et al. beta-Carotene in breast milk and serum is increased after a single beta-carotene dose. Am J Clin Nutr 1997;66:52-61.9209169
13 Johnson EJ, Qin J, Krinsky NI, et al. Beta-carotene isomers in human serum, breast milk and buccal mucosa cells after continuous oral doses of all-trans and 9-cis beta-carotene. J Nutr 1997;127:1993-9.9311956
14 Gossage CP, Deyhim M, Yamini S, et al. Carotenoid composition of human milk during the first month postpartum and the response to beta-carotene supplementation. Am J Clin Nutr 2002;76:193-7.12081834
15 Dijkhuizen MA, Wieringa FT, West CE, et al. Zinc plus beta-carotene supplementation of pregnant women is superior to beta-carotene supplementation alone in improving vitamin A status in both mothers and infants. Am J Clin Nutr 2004;80:1299-307.15531679
16 Rice AL, Stoltzfus RJ, de Francisco A, et al. Maternal vitamin A or beta-carotene supplementation in lactating Bangladeshi women benefits mothers and infants but does not prevent subclinical deficiency. J Nutr 1999;129:356-65.10024613
17 Villamor E, Saathoff E, Bosch RJ, et al. Vitamin supplementation of HIV-infected women improves postnatal child growth. Am J Clin Nutr 2005;81:880-8.15817867
18 Webb AL, Aboud S, Furtado J, et al. Effect of vitamin supplementation on breast milk concentrations of retinol, carotenoids and tocopherols in HIV-infected Tanzanian women. Eur J Clin Nutr 2009;63:332-9.17940544
19 Haftel L, Berkovich Z, Reifen R. Elevated milk beta-carotene and lycopene after carrot and tomato paste supplementation. Nutrition 2015;31:443-5.25701332

## Substance Identification

### Substance Name

Beta-Carotene

### CAS Registry Number

7235-40-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Carotenoids

Food

Vitamins